# Coagulation Factor VIIa

CASRN: 102786-61-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of coagulation factor VIIa during breastfeeding. Because it is a large protein molecule, the amount in milk is likely to be very low and absorption is unlikely because it is probably destroyed in the infant's gastrointestinal tract. Until more data become available, coagulation factor VIIa should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Coagulation Factor VIIa

### CAS Registry Number

102786-61-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Blood Coagulation Factors

Coagulants